# Ceftazidime

CASRN: 78439-06-2

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that ceftazidime produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Ceftazidime and is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. Ceftazidime 2 grams was given to 11 women intravenously every 8 hours for 5 days. The average trough milk level was 3.8 mg/L before the next dose, 5.2 mg/L 1 hour after the dose and 4.5 mg/L at 3 hours after the dose. These differences were not statistically significant. The average drug concentrations in milk were 3.9 mg/L for samples before the seventh dose and 4.9 mg/L in milk samples after the seventh dose, but this difference was not statistically significant. There was no correlation between the mother's weight and the ceftazidime milk levels.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Blanco JD, Jorgensen JH, Castaneda YS, et al. Ceftazidime levels in human breast milk. Antimicrob Agents Chemother 1983;23:479-80.6342531

## Substance Identification

### Substance Name

Ceftazidime

### CAS Registry Number

78439-06-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins